# Roxithromycin

CASRN: 80214-83-1

## Drug Levels and Effects

### Summary of Use during Lactation

Roxithromycin is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. Because of the low levels of roxithromycin in breastmilk, it would not be expected to cause adverse effects in breastfed infants. Monitor the infant for possible effects on the gastrointestinal flora, such as diarrhea, candidiasis (thrush, diaper rash). Unconfirmed epidemiologic evidence indicates that the risk of infantile hypertrophic pyloric stenosis might be increased by maternal use of macrolide antibiotics during the first two weeks of breastfeeding, but others have questioned this relationship.

### Drug Levels

Maternal Levels. Ten healthy lactating women who were at least 1 month postpartum were given a single 300 mg oral dose of roxithromycin. Milk was collected in 2-hour aliquots for 24 hours, then in 12-hour aliquots until 48 hours after the dose. The drug was detectable between 2 and 10 hours after the dose. The average milk concentration of the first 12 hours after the dose was 0.26 mg/L, or about 0.8% of the weight-adjusted maternal dosage. A total of 0.14 mg of roxithromycin was recovered from milk during the collection period.[1,2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A cohort study of infants diagnosed with infantile hypertrophic pyloric stenosis found that affected infants were 2.3 to 3 times more likely to have a mother taking a macrolide antibiotic during the 90 days after delivery. Stratification of the infants found the odds ratio to be 10 for female infants and 2 for male infants. All of the mothers of affected infants nursed their infants. Most of the macrolide prescriptions were for erythromycin, but 19% were for roxithromycin. However, the authors did not state which macrolide was taken by the mothers of the affected infants.[3]

A retrospective database study in Denmark of 15 years of data found a 3.5-fold increased risk of infantile hypertrophic pyloric stenosis in the infants of mothers who took a macrolide during the first 13 days postpartum, but not with later exposure. The proportion of infants who were breastfed was not known, but probably high. The proportion of women who took each macrolide was also not reported.[4]

A study comparing the breastfed infants of mothers taking amoxicillin to those taking a macrolide antibiotic found no instances of pyloric stenosis. Sixty-seven percent of the infants exposed to a macrolide in breastmilk were exposed to roxithromycin. Adverse reactions occurred in 12.7% of the infants exposed to macrolides which was similar to the rate in amoxicillin-exposed infants. Reactions included rash, diarrhea, loss of appetite, and somnolence.[5]

Two meta-analyses failed to demonstrate a relationship between maternal macrolide use during breastfeeding and infantile hypertrophic pyloric stenosis.[6,7]

### Effects on Lactation and Breastmilk

In a double-blind, controlled study in Gambia, women who were nasopharyngeal carriers of Staphylococcus aureus, Streptococcus pneumoniae or group B streptococcus were given a single 2 gram dose of azithromycin during labor. Milk samples from women who received azithromycin had 9.6% prevalence of carriage of the organisms compared to 21.9% in women who received placebo. Nasopharyngeal carriage in mothers and infants was also reduced on day 6 postpartum.[7]

### Alternate Drugs to Consider

Azithromycin, Clarithromycin, Erythromycin

### References

1 Puri SK, Lassman HB. (1987). Roxithromycin: A pharmacokinetic review of a macrolide. J Antimicrob Chemother.
2 Lassman HB, Puri SK, Ho I, et al. (1988). Pharmacokinetics of roxithromycin (RU 965). J Clin Pharmacol.
3 Sørensen HT, Skriver MV, Pedersen L, et al. (2003). Risk of infantile hypertrophic pyloric stenosis after maternal postnatal use of macrolides. Scand J Infect Dis.
4 Lund M, Pasternak B, Davidsen RB, et al. (2014). Use of macrolides in mother and child and risk of infantile hypertrophic pyloric stenosis: Nationwide cohort study. BMJ.
5 Goldstein LH, Berlin M, Tsur L, et al. (2009). The safety of macrolides during lactation. Breastfeed Med.
6 Abdellatif M, Ghozy S, Kamel MG, et al. (2019). Association between exposure to macrolides and the development of infantile hypertrophic pyloric stenosis: A systematic review and meta-analysis. Eur J Pediatr.
7 Almaramhy HH, Al-Zalabani AH. (2019). The association of prenatal and postnatal macrolide exposure with subsequent development of infantile hypertrophic pyloric stenosis: A systematic review and meta-analysis. Ital J Pediatr.

## Substance Identification

### Substance Name

Roxithromycin

### CAS Registry Number

80214-83-1

### Drug Class

Breast Feeding

Lactation

Anti-Bacterial Agents

Anti-Infective Agents

Macrolides